# Ampicillin

CASRN: 69-53-4

## Drug Levels and Effects

### Summary of Use during Lactation

Substantial information indicates that ampicillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Ampicillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After an ampicillin oral dose of 500 mg every 6 hours for 3 days, milk levels fluctuated little and ranged from 0.575 to 1 mg/L (mean 0.8 mg/L) at various times in one mother and 0.014 mg/L to 0.0675 mg/L (average 0.03 mg/L) in another.[1]

In 10 mothers given ampicillin 1.5 or 2 grams daily by mouth for 3 doses had milk levels ranging from 0.03 to 0.2 mg/L. Another mother receiving 3 grams daily by mouth had milk levels of 0.08 to 0.3 mg/L. In 3 mothers who received 2 grams daily intramuscularly, milk levels ranged from 0.3 to 0.9 mg/L and in 3 mothers who received 4 grams daily intramuscularly had milk levels of 0.4 to 0.9 mg/L. In all cases, peak milk levels occurred 3 hours after the dose. The breastfed infant was estimated to receive from 0.08 to 0.2 mg daily of ampicillin with these doses.[2]

A study in postpartum women with endometritis who received ampicillin 1 or 2 grams infused intravenously over 20 minutes found the average milk levels of ampicillin to be 1.7 mg/L with the highest level observed 3 mg/L.[3]

In 15 women receiving ampicillin 500 mg 4 times daily by intramuscular injection, average milk ampicillin levels were as follows: 0.11 mg/L at 30 minutes after the injection; 0.21 mg/L at 1 hour, 0.17 at 2 hours, 0.27 mg/L at 4 hours and 0.26 mg/L at 6 hours after the injection.[4]

In 13 women with mastitis who received 1 gram of ampicillin orally 4 times daily, the average milk concentrations ranged from 0.6 to 1.05 mg/L.[5]

In 15 women given a single 2 grams dose of ampicillin intravenously, milk levels averaged 1.1 mg/L 2 hours after the dose.[6]

Infant Levels. Thirteen women with mastitis received 1 gram of ampicillin orally 4 times daily. Ampicillin was detectable in the urine in only 2 of 8 of the breastfed infants in whom it was measured.[5]

### Effects in Breastfed Infants

An uncontrolled observation of the breastfed infants of mothers taking ampicillin noted a seeming increase in cases of diarrhea and candidiasis that was attributed to ampicillin in breastmilk.[7]

In a prospective follow-up study, 5 nursing mothers reported taking ampicillin (dosage unspecified). One mother reported diarrhea in her infant. No rashes or candidiasis were reported among the exposed infants.[8]

A small, controlled, prospective study had mothers monitor their infants for signs of adverse effects (furring of the tongue, feeding difficulties, changes in stool frequency and consistency, diaper rash, and skin rash). Weight change and the development of jaundice were also recorded. No statistical differences in these parameters were found between the infants of the control mothers and those of mothers taking ampicillin.[9]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Lohmeyer H, Halfpap E. [Pharmacokinetic studies and clinical experiences with ampicillin during treatment of infections of the urogenital tract of the female]. Z Geburtshilfe Gynakol 1965;164:184-202.5887161
2 Pons G, Rey E. Antibiotics excretion in breast milk. Med Mal Infect 1994;24 (Special Issue 1):1088-106.
3 Foulds G, Miller RD, Stankewich JP, et al. The pharmacokinetics of subactam and ampicillin in postpartum women. In, Spitzy KH, Karrer K, eds. Proc 13th Int Congress Chemother 1983;1:23/17-23/22.
4 Amiraslanova LA, Emel'yanova AI, Fursova SA, et al. Some aspects of ampicillin, kanamycin and cefuroxim pharmacokinetics in puerperant patients with endometritis. Akush Ginekol (Mosk) 1985;10 14-7.2934996
5 Peiker G, Schroder S. The concentration of oxacillin and ampicillin (Penstabil) in mother's milk in puerperal mastitis. Pharmazie 1986;41:793-5.3562514
6 Zhang Y, Zhang Q, Xu Z. Tissue and body fluid distribution of antibacterial agents in pregnant and lactating women. Zhonghua Fu Chan Ke Za Zhi 1997;32:288-92.9596854
7 Williams M. Excretion of drugs in milk. Pharm J 1976;217:219.
8 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
9 Campbell AC, McElnay JC, Passmore CM. The excretion of ampicillin in breast milk and its effect on the suckling infant. Br J Clin Pharmacol 1991;31:230p. doi:10.1111/j.1365-2125.1991.tb05523.x

## Substance Identification

### Substance Name

Ampicillin

### CAS Registry Number

69-53-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins